# Carbimazole

CASRN: 22232-54-8

## Drug Levels and Effects

### Summary of Use during Lactation

Carbimazole is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. Doses of carbimazole of 15 mg daily have not adversely affected the few breastfed infants studied. Carbimazole is a prodrug for methimazole which has been studied extensively during breastfeeding; maternal methimazole therapy does not affect thyroid function or intellectual development in breastfed infants with doses up to 20 mg daily. Some experts now recommend that methimazole should be considered the antithyroid drug of choice in nursing mothers.[1-4]

### Drug Levels

Carbimazole is a prodrug that is rapidly converted to the active drug methimazole. The methimazole dose is 61% of the carbimazole dose after conversion.

Maternal Levels. Five lactating women who were 2 to 6 weeks postpartum were given a single dose of carbimazole 40 mg orally, equivalent to 24.5 mg of methimazole. Methimazole milk concentrations were measured every hour for 8 hours. The average milk concentration was 182 mcg/L at 1 hour after the dose and decreased to 83 mcg/L at 8 hours after the dose. The average total amount of methimazole excreted into milk over 8 hours was 34 mcg (range 29 to 47 mcg).[5]

Four women were receiving 10 to 20 mg of carbimazole daily. Milk samples were obtained on days 4, 7, 10, and 42 and at 3 and 6 months postpartum. The highest methimazole milk level was 75 mcg/L in a woman taking carbimazole 5 mg 4 times daily. The average milk level in all samples was 43.5 mcg/L.[6]

A mother with twins began taking carbimazole 30 mg daily 2 months postpartum. The dosage was lowered as she became euthyroid. Free methimazole was measured in breastmilk 10 times between weeks 2 and 16 of therapy. The mean milk methimazole concentration was 43 mcg/L (range 0 to 92 mcg/L), although the exact dosage the mother was taking during all of these measurements was not stated. The peak milk methimazole concentration occurred about 4 hours after the dose.[7]

Five mothers received carbimazole 10 to 20 mg daily during pregnancy and for 2 to 26 weeks of lactation. Steady-state concentrations of carbimazole (assayed as methimazole) in milk were 6 to 51 mcg/L. The estimated quantity of carbimazole ingested by the infants in milk was 0.5 to 3.2% of the weight-adjusted maternal daily dose.[8]

A woman (time postpartum not stated) given a single dose of 10 mg of carbimazole excreted a total of 0.47% of the dose in her breastmilk in 24 hours.[9]

Infant Levels. A mother with twins began taking carbimazole 30 mg daily 2 months postpartum. The dosage was lowered as she became euthyroid. The infants were breastfed (extent not stated) and plasma methimazole concentrations were measured between weeks 1 and 16 of therapy. The highest plasma levels occurred between 2 and 4 hours after a maternal dose. Average serum level in one twin averaged 45 mcg/L (range 0 to 105 mcg/L) over a 15 week period and the average serum level in the other twin was 52 mcg/L (range 0 to 156 mcg/L) over 14 weeks, with the highest values reported with a maternal dose of 30 mg daily.[7]

### Effects in Breastfed Infants

Eleven mothers were taking oral carbimazole in dosages ranging from 5 to 20 mg daily during pregnancy and 5 to 15 mg daily during breastfeeding (extent not stated). None of the 12 infants, including one set of twins, had a serum thyroxine (T4) concentration below the lower limit of normal on day 4 of life. Thyrotropin (TSH) concentrations were normal in all infants when measured at various times over the first 21 days postpartum.[10]

Four women were receiving 10 to 20 mg of carbimazole daily. Infant blood samples were obtained on days 4, 7, 10, and 42 and at 3 and 6 months postpartum. Thyroid function was normal in 3 infants. In one infant, the TSH was elevated for the first 10 days of life.[6]

A mother with twins began taking carbimazole 30 mg daily 2 months postpartum. The dosage was lowered as she became euthyroid. The infants were breastfed (extent not stated) and clinical and laboratory examinations were performed over the following 4 months. There was no evidence of alterations in thyroid function.[7]

Fifteen mothers received carbimazole 10 to 20 mg daily for 12 to 40 weeks during pregnancy and 9 continued to take the drug during 2 to 26 weeks of lactation. Their infants were monitored for up to 18 months. Infant thyroid function was within nornml over this period, the range of mean values for individual infants being TSH 1.4 to 5.9 millliunits/L, free T3 6.2 to 9.3 pmol/L and T4 104 to 189 nmol/L. Physical examination at intervals for 2 to 18 months was normal in all infants who received carbimazole and Griffiths mental development scales were normal in all 6 infants who were assessed at 18 months.[8]

A mother was taking carbimazole 50 mg once weekly during pregnancy and postpartum. Her infant was exclusively breastfed for the first 84 days of life and had clinical and laboratory examinations performed over the first 4 months of life. Although the infant's tone and deep tendon reflexes were slightly increased and she was easily irritable, serum thyroid hormone levels were normal as was her growth. No symptoms or signs of hypothyroidism were observed.[11]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Methimazole, Propylthiouracil

### References

1 Karras S, Tzotzas T, Krassas GE. Antithyroid drugs used in the treatment of hyperthyroidism during breast feeding. An update and new perspectives. Hormones (Athens) 2009;8:254–7.20058397
2 Hudzik B, Zubelewicz-Szkodzinska B. Anti-thyroid drugs during breastfeeding. Clin Endocrinol (Oxf) 2016;85:827–30.27561657
3 Amino N, Arata N. Thyroid dysfunction following pregnancy and implications for breastfeeding. Best Pract Res Clin Endocrinol Metab 2020;34:101438.32651061
4 Korevaar TIM, Leung AM, Alexander EK, et al. American Thyroid Association 2026 Guidelines for Thyroid Disease in Preconception, Pregnancy, and Postpartum. Thyroid 2026;36:481–544.42219800
5 Johansen K, Andersen AN, Kampmann JP, et al. Excretion of methimazole in human milk. Eur J Clin Pharmacol 1982;23:339–41.6897386
6 Notarianni LJ, Humphries SJ, Ferrie JE, et al. Effect of carbimazole taken during lactation on the neonate Acta Pharmacol Toxicol (Copenh) 1986;59 (Suppl 5 Pt 2) doi:10.1111/j.1600-0773.1986.tb02697.x
7 Rylance GW, Woods CG, Donnelly MC, et al. Carbimazole and breastfeeding. Lancet 1987;329:928.2882332
8 Bennett PN, Cain APR, Dunster GD, et al. Thyroid function, physical and mental development in infants who received carbimazole during fetal life and lactation. Eur J Clin Pharmacol 1989;36 (Suppl):A153. doi:10.1007/BF02411402
9 Fumarola A, Di Fiore A, Dainelli M, et al. Therapy of hyperthyroidism in pregnancy and breastfeeding. Obstet Gynecol Surv 2011;66:378–85.21851752
10 Lamberg BA, Ikonen E, Osterlund K, et al. Antithyroid treatment of maternal hyperthroidism during lactation. Clin Endocrinol (Oxf) 1984;21:81–7.6744638
11 Verd S, Cardo E. Well-being of a baby breast fed by her mother on carbimazol treatment. J Hum Lact 1998;14:206–7.10205431

## Substance Identification

### Substance Name

Carbimazole

### CAS Registry Number

22232-54-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antithyroid Agents

Thionamides